# Deflazacort

CASRN: 14484-47-0

Chemical structure

## Drug Levels and Effects

### Summary of Use during Lactation

Because no information is available on the use of deflazacort during breastfeeding, an alternate corticosteroid may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

None reported with any corticosteroid.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Methylprednisolone, Prednisolone, Prednisone

## Substance Identification

### Substance Name

Deflazacort

### CAS Registry Number

14484-47-0

### Drug Class

- Breast Feeding
- Lactation
- Corticosteroids, Systemic
- Glucocorticoids
- Anti-Inflammatory Agents